# Molindone

CASRN: 7416-34-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with molindone during breastfeeding, other antipsychotic agents are preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Galactorrhea has been reported with molindone.[1,2] Hyperprolactinemia appears to be the cause of the galactorrhea.[3-5] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[6] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Kahn JL. More on galactorrhea associated with molindone. Am J Psychiatry 1979;136:1617-8 574364
2 Wesp CE, Jr, Annitto W, Feinsod R. Galactorrhea associated with molindone. Am J Psychiatry 1979;136:975 572143
3 Turkington RW. Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med 1972;130:349-54 4560178
4 Turkington RW. Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab 1972;34:62-6 5061776
5 Meltzer HY, Fang VS. The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry 1976;33:279-86 1259521
6 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62 11913677

## Substance Identification

### Substance Name

Molindone

### CAS Registry Number

7416-34-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents